# Spironolactone

CASRN: 52-01-7

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that spironolactone is poorly excreted into breastmilk. Case of mothers breastfeeding during spironolactone therapy reported no adverse effects in infants. Spironolactone appears to be acceptable to use during breastfeeding.

### Drug Levels

Maternal Levels. The major metabolite of spironolactone, canrenone, was measured in the serum and milk of a 17-day postpartum woman who was taking 25 mg of spironolactone four times daily. Milk canrenone levels 2 hours after the dose were 104 mcg/L, and 47 mcg/L at 14.5 hours after the dose. The authors estimated that the nursing infant would receive about 0.2% of the mother's total daily dosage in the form of canrenone.[1] Active sulfur-containing metabolites were not measured.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In 17-day-old breastfed (extent not stated) infant whose mother was taking 25 mg of spironolactone 4 times daily since pregnancy, serum sodium and potassium remained normal.[1]

Spironolactone 75 mg every other day was taken orally by a mother while nursing a newborn. She was also taking 400 mg of bretylium tosylate every 8 hours, atenolol 25 mg daily, propranolol 20 mg 3 times a day, and multivitamin, potassium and magnesium supplements. Jaundice, thought to be unrelated to the drug, occurred at 60 hours of age, but resolved. The infant had appropriate weight gain and development during the first 4 months of life.[2]

A transgender woman took and spironolactone 50 mg twice daily to suppress testosterone, domperidone 10 mg three times daily, increasing to 20 mg four times daily, oral micronized progesterone 200 mg daily and oral estradiol to 8 mg daily and pumped her breasts 6 times daily to induce lactation. After 3 months of treatment, estradiol regimen was changed to a 0.025 mg daily patch and the progesterone dose was lowered to 100 mg daily. Two weeks later, she began exclusively breastfeeding the newborn of her partner. Breastfeeding was exclusive for 6 weeks, during which the infant's growth, development and bowel habits were normal. The patient continued to partially breastfeed the infant for at least 6 months.[3]

A woman with Gitleman syndrome took spironolactone in an unspecified dosage along with potassium and magnesium supplements for at least 4 months while breastfeeding her infant. No adverse infant effects were reported.[4]

### Effects on Lactation and Breastmilk

Intense diuresis can suppress lactation;[5,6] however, it is unlikely that spironolactone alone is sufficiently potent to cause this effect.

Spironolactone can cause gynecomastia. The estimated risk is 52 cases per 1000 patients treated, which is 8.4 times the baseline risk.[7]

A transgender woman was taking sublingual estradiol 4 mg twice daily, spironolactone 100 mg twice daily and progesterone 200 mg at bedtime for gender-affirming therapy. In order to prepare for the birth of the infant being carried by her partner, sublingual estradiol was increased to 6 mg twice daily and progesterone was increased to 400 mg at bedtime. Domperidone 10 mg twice daily was also started to increase serum prolactin levels and later increased to 20 mg 4 times daily. Before the delivery date, progesterone was stopped, spironolactone was decreased to 100 mg daily and estradiol was changed to 25 mcg per day transdermally. At day 59 postpartum, estradiol was changed to 2 mg per day sublingually and spironolactone was increased to 100 mg twice daily. The patient was able to produce up to 240 mL of milk daily containing typical macronutrient and oligosaccharide levels.[8]

### References

1 Phelps DL, Karim A. Spironolactone: Relationship between concentrations of dethioacetylated metabolite in human serum and milk. J Pharm Sci 1977;66:1203.894512
2 Gutgesell M, Overholt E, Boyle R. Oral bretylium tosylate use during pregnancy and subsequent breastfeeding: A case report. Am J Perinatol 1990;7:144-5.2331276
3 Reisman T, Goldstein Z. Case report: Induced lactation in a transgender woman. Transgend Health 2018;3:24-6.29372185
4 de Jong MFC, Riphagen IJ, Kootstra-Ros JE, Groenewout M. Potassium and magnesium in breast milk of a woman with Gitelman syndrome. Kidney Int Rep 2022;7:1720-1.35812288
5 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;277:1353-4.
6 Cominos DC, Van Der Walt A, Van Rooyen AJ. Suppression of postpartum lactation with furosemide. S Afr Med J 1976;50:251-2.3858
7 Trinchieri A, Perletti G, Magri V, et al. Drug-induced gynecomastia: A systematic review and meta-analysis of randomized clinical trials. Arch Ital Urol Androl 2021;93:489-96.34933535
8 Delgado D, Stellwagen L, McCune S, et al. Experience of induced lactation in a transgender woman: Analysis of human milk and a suggested protocol. Breastfeed Med 2023;18:888-93.37910800

## Substance Identification

### Substance Name

Spironolactone

### CAS Registry Number

52-01-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Diuretics

Mineralocorticoid Receptor Antagonists